# Tenofovir Alafenamide

CASRN: 379270-37-8

## Drug Levels and Effects

### Summary of Use during Lactation

Tenofovir is available in the U.S. in two forms, tenofovir disoproxil fumarate and tenofovir alafenamide. Both release tenofovir, but tenofovir disoproxil fumarate releases tenofovir in the bloodstream whereas tenofovir alafenamide enters cells before releasing tenofovir. Exposure of the breastfed infant to tenofovir is trivial in HIV-positive mothers and in HIV-negative mothers treated for HIV prophylaxis or hepatitis B infection. Among HIV-positive mothers who have breastfed during tenofovir disoproxil fumarate therapy, no infant adverse effects have occurred up to 2 years of age. Tenofovir alafenamide results in even lower milk levels and infant dosages than tenofovir disoproxil fumarate. Achieving and maintaining viral suppression with antiretroviral therapy decreases breastfeeding transmission risk to less than 1%, but not zero. Individuals with HIV who are on antiretroviral therapy with a sustained undetectable viral load and who choose to breastfeed should be supported in this decision. If a viral load is not suppressed, banked pasteurized donor milk or formula is recommended.[1,2] Pre-exposure prophylaxis (PrEP) regimens containing tenofovir are acceptable for use in HIV-negative nursing mothers.[3]

In hepatitis B, expert reviews of available data and professional guidelines state that there is no justification for contraindicating the use of tenofovir during breastfeeding.[4-7] No differences exist in infection rates between breastfed and formula-fed infants born to hepatitis B-infected women, as long as the infant receives hepatitis B immune globulin and hepatitis B vaccine at birth.

### Drug Levels

Tenofovir has poor bioavailability. The more bioavailable tenofovir alafenamide enters cells before releasing tenofovir. Tenofovir is metabolized intracellularly to the active metabolite tenofovir diphosphate. The bioavailability of tenofovir and tenofovir diphosphate from breastmilk are not known, but presumed to be extremely low.

Maternal Levels. Fifty-two pregnant women with hepatitis B were given either tenofovir alafenamide (n = 26) or tenofovir disoproxil fumarate (n = 26) from 28 weeks of pregnancy to delivery to prevent mother-to-child transmission. Dosages were not stated. Milk samples obtained 6 hours after delivery from the women taking tenofovir alafenamide contained no detectable (<0.5 mcg/L) tenofovir. Milk samples obtained 6 hours after delivery from the women taking tenofovir disoproxil fumarate contained a median of 12.83 (IQR 7.46-29.46) mcg/L of tenofovir.[8]

Thirty-six lactating women with hepatitis B were given tenofovir alafenamide 25 mg once a day with food and another 36 were given 300 mg of tenofovir disoproxil fumarate once a day. Breast milk samples from both groups were collected at 48 hours postpartum, but the time with respect to doses was not reported. Tenofovir measured by mass spectrometry was undetectable (lower limit of assay not specified) in breastmilk in all of the women given tenofovir alafenamide, while only 4 of the women who received tenofovir disoproxil fumarate had undetectable tenofovir levels. The average milk tenofovir levels in the remaining 32 mothers was 19.2 mcg/L.[9]

Women with hepatitis B received either tenofovir alafenamide 25 mg (n = 12) or tenofovir disoproxil fumarate 300 mg (n = 4) daily from 24 to 28 weeks of gestation until the 4th week postpartum. Milk samples were collected before the dose and 1, 2, 4, 6, 8 hours after the dose on the 3rd day postpartum. Trough and 1-hour post-dose milk samples were also collected on days 15 and 30 postpartum in mothers who received tenofovir alafenamide. Mothers who received tenofovir alafenamide had an average peak milk concentration of 101 mcg/L at a median peak time of 4 hours after the dose. Trough and 1-hour milk tenofovir levels decreased by about 45% at 15 and 30 days postpartum in the tenofovir alafenamide group.[10] Using the highest milk level on day 3 postpartum, infants would receive a maximum of 15 mcg/kg daily; the average level would be considerably lower.

Eight women with chronic hepatitis B took oral tenofovir alafenamide 25 mg daily. Milk samples were taken pre-dose, and 0.5 hours, 1 to 1.5 hours, 2,5 to 3.5 hours, 5 to 6 hours, 8 hours and 24 hours after a dose and analyzed for tenofovir alafenamide and tenofovir. For tenofovir alafenamide, the median steady-state peak breastmilk level was 1.7 mcg/L (IRQ 0.22 to 5.65 mcg/L) at a median of 0.5 hours after a dose. The median half-life in milk was 0.5 hours and by 6 to 8 hours milk levels were undetectable (<0.05 mcg/L) in 7 of the 8 women. The median breastmilk tenofovir alafenamide concentration was 0.125 mcg/L (range 0.06 to 11.6 mcg/L), which resulted in an estimated infant dose of 18.75 ng/kg daily and a relative infant dose of 0.005% of the maternal weight-adjusted dose. For tenofovir, the median steady-state peak breastmilk level was 53.1 mcg/L (IRQ 29.6 to 57.8 mcg/L) at a median of 5.5 hours after a dose. The median half-life of tenofovir in milk was 27.7 hours. The mean tenofovir concentration in milk was 33.3 mcg/L in breastmilk, which would result in an estimated infant dosage of about 5 mcg/kg daily.[11]

Three mothers taking tenofovir alafenamide 25 mg once daily provided 5 milk samples at a median of 8.5 hours after a dose. The median drug concentration in milk was 45 mcg/L, which resulted in an estimated infant dosage of 7 mcg/kg daily.[12]

Women in a 9-country clinical trial were randomly assigned to receive either dolutegravir 50 mg once daily with a fixed-dose combination of emtricitabine 200 mcg plus tenofovir alafenamide 25 mg once daily, or dolutegravir 50 mg once daily with a fixed-dose combination of emtricitabine 200 mg plus tenofovir disoproxil fumarate 300 mg once daily. One milk sample was obtained at 6 weeks postpartum (n = 98). Tenofovir was below the limit of quantification in nearly all samples. The median RID was 0.0%.[13]

Infant Levels. Eight mothers with chronic hepatitis B who were predominantly breastfeeding took oral tenofovir alafenamide 25 mg daily. Infant urine was collected from the time of the dose to 8 hours after the dose. Tenofovir was detectable in 3 of 7 infant urine samples with the remaining 4 samples having undetectable (<10 mcg/L) levels. The three detectable infant urine concentrations of tenofovir were 12, 24 and 25 mcg/L.[11]

An infant was breastfed by a mother taking tenofovir alafenamide 25 mg daily, although the extent of breastfeeding was not sated. The infant’s serum tenofovir concentration taken19 hours after maternal drug intake at 1 month of age was undetectable.[12]

Women in a 9-country clinical trial were randomly assigned to receive either dolutegravir 50 mg once daily with a fixed-dose combination of emtricitabine 200 mcg plus tenofovir alafenamide 25 mg once daily, or dolutegravir 50 mg once daily with a fixed-dose combination of emtricitabine 200 mg plus tenofovir disoproxil fumarate 300 mg once daily. One infant blood sample was obtained at 6 weeks postpartum (n = 180). The concentration in infant plasma was below the limit of quantification in nearly all infants.[13]

### Effects in Breastfed Infants

Numerous studies have demonstrated the safety of tenofovir disoproxil fumarate for breastfed infants.[14-25] See the LactMed record on tenofovir disoproxil fumarate for more information.

An open-label, controlled, multicenter phase 3 trial women who were confirmed HIV-positive were randomized to receive one of 3 regimens: dolutegravir, emtricitabine, and tenofovir alafenamide (n = 208); dolutegravir, emtricitabine, and tenofovir disoproxil fumarate (n = 202); or efavirenz, emtricitabine, and tenofovir disoproxil fumarate (n = 207). The regimens were started at 14 to 28 weeks of pregnancy and continued postpartum. Of the 617 liveborn infants, 99% were breastfeeding at time of last infant HIV test, which was as late as 50 weeks of age. The mean infant duration on the study was 47.6 weeks of age. Infants who had any clinical or laboratory adverse event of grade 3 or higher ranged from 25 to 31%, but was not statistically significant between groups. Dolutegravir-containing regimens resulted in lower rates of virological failure, HIV drug resistance, and infant mortality up to 50 weeks postpartum compared with efavirenz, emtricitabine, and tenofovir disoproxil fumarate.[26]

### Effects on Lactation and Breastmilk

No information is available on tenofovir alafenamide, but some studies on tenofovir disoproxil fumarate found that mothers breastfed at lower rates when taking antiviral combination therapies that included tenofovir disoproxil fumarate. See tenofovir disoproxil fumarate.

### Alternate Drugs to Consider

(Hepatitis B) Interferon Alfa, Lamivudine

### References

1 World Health Organization. Consolidated guidelines on HIV prevention, testing, treatment, service delivery and monitoring: Recommendations for a public health approach. 2021 https://www.who.int/publications/i/item/9789240031593
2 Department of Health and Human Services. Recommendations for the use of antiretroviral drugs during pregnancy and interventions to reduce perinatal HIV transmission in the United States. 2024 https://clinicalinfo.hiv.gov/sites/default/files/guidelines/documents/perinatal-hiv/guidelines-perinatal.pdf
3 Hodges-Mameletzis I, Fonner VA, Dalal S, . Pre-exposure prophylaxis for HIV prevention in women: Current status and future directions. Drugs 2019;79:1263-76.31309457
4 Pak K, Ibrahim B, Saab S. Safety of tenofovir disoproxil fumarate among breastfeeding infants of patients with chronic hepatitis B: A systematic review. J Viral Hepat 2024;31:760-7.39206721
5 WHO. Guidelines for the prevention, diagnosis, care and treatment for people with chronic hepatitis B infection. https://www.who.int/publications/i/item/9789240090903
6 EASL Clinical Practice Guidelines on the management of hepatitis B virus infection. J Hepatol 2025;83:502-83.40348683
7 Ghany MG, Pan CQ, Lok AS, . AASLD ISDA Practice Guideline on treatment of chronic hepatitis B. Hepatology 2026;83:974-97.41186418
8 Bojun L, Ye G, Yan W, . Tenofovir (TFV) or tenofovir alafenamide (TAF) concentration in breast milk and infants’ cord blood, with tenofovir disoproxil fumarate (TDF) or TAF treatment in pregnancy. Hepatol Int 2020;14 (Suppl 1):S78. doi:10.1007/s12072-020-10030-4
9 Li B, Liu Z, Liu X, . Efficacy and safety of tenofovir disoproxil fumarate and tenofovir alafenamide fumarate in preventing HBV vertical transmission of high maternal viral load. Hepatol Int 2021;15:1103-8.34312798
10 Yang N, Zhou G, Cheng X, . Distribution evaluation of tenofovir in the breast milk of mothers with HBeAg-positive chronic HBV infection after treatment with tenofovir alafenamide and tenofovir disoproxil fumarate by a sensitive UPLC-MS/MS method. Front Pharmacol 2021;12:734760.34483946
11 Kayes T, Crane H, Symonds A, . Plasma and breast milk pharmacokinetics of tenofovir alafenamide in mothers with chronic hepatitis B infection. Aliment Pharmacol Ther 2022;56:510-8.35599363
12 Aebi-Popp K, Kahlert CR, Crisinel PA, . Transfer of antiretroviral drugs into breastmilk: A prospective study from the Swiss Mother and Child HIV Cohort Study. J Antimicrob Chemother 2022;77:3436-42.36177836
13 Nguyen T, Chae JW, Ziemba L, . Breast milk transfer and infant exposures to dolutegravir, tenofovir, and tenofovir alafenamide: Results from IMPAACT 2010/VESTED. J Acquir Immune Defic Syndr 2026;101:296-301.41195894
14 Pan CQ, Mi LJ, Bunchorntavakul C, . Tenofovir disoproxil fumarate for prevention of vertical transmission of hepatitis B virus infection by highly viremic pregnant women: A case series. Dig Dis Sci 2012;57:2423-9.22543886
15 Ganne-Carrie N, Causse X, Zarski JP, . Efficacy and safety results of tenofovir DF (TDF) treatment from the first trimester in HBV pregnant women in real-life clinical practice. Hepatology 2013;58 (Suppl 1):664A-5A. doi:10.1002/hep.26727
16 Mugwanya KK, Hendrix CW, Mugo NR, . Pre-exposure prophylaxis use by breastfeeding HIV-uninfected women: A prospective short-term study of antiretroviral excretion in breast milk and infant absorption. PLoS Med 2016;13:e1002132.27676257
17 Floridia M, Liotta G, Andreotti M, . Levels of bone markers in a population of infants exposed in utero and during breastfeeding to tenofovir within an Option B+ programme in Malawi. J Antimicrob Chemother 2016;71:3206-11.27494909
18 Marcellin P, Zoulim F, Hezode C, . Effectiveness and safety of tenofovir disoproxil fumarate in chronic hepatitis B: A 3-year, prospective, real-world study in France. Dig Dis Sci 2016;61:3072-83.26821154
19 Wang M, Bian Q, Zhu Y, . Real-world study of tenofovir disoproxil fumarate to prevent hepatitis B transmission in mothers with high viral load. Aliment Pharmacol Ther 2019;49:211-7.30506691
20 Noguchi LM, Montgomery ET, Biggio JR, . Detectable tenofovir levels in breastfeeding infants of mothers exposed to topical tenofovir. Antimicrob Agents Chemother 2016;60:5616-9.27401570
21 Kapito-Tembo AP, Bauleni A, Wesevich A, . Growth and neurodevelopment outcomes in HIV, tenofovir and efavirenz exposed breastfed infants in PMTCT Option B+ program in Malawi. J Acquir Immune Defic Syndr 2021;86:81-90.33027153
22 Li S, Jin J, Jiang Y, . The low level of tenofovir in breast milk supports breastfeeding in HBV-infected mothers. Int J Antimicrob Agents 2023:106726.36646229
23 Vhembo T, Baltrusaitis K, Tierney C, . Bone and renal health in infants with or without breastmilk exposure to tenofovir-based maternal antiretroviral treatment in the PROMISE randomized trial. J Acquir Immune Defic Syndr 2023;93:431-7.37199427
24 Reddy K, Naidoo KL, Lombard C, . In-utero exposure to tenofovir-containing pre-exposure prophylaxis and bone mineral content in HIV-unexposed infants in South Africa. J Int AIDS Soc 2024;27:e26379.39528419
25 Noguchi LM, Owor M, Mgodi NM, . Safety and drug quantification of the dapivirine vaginal ring and oral pre-exposure prophylaxis in breastfeeding mother-infant pairs (MTN-043): A phase 3B, open-label, randomised trial. Lancet HIV 2025;2:e180-e90.
26 Chinula L, Ziemba L, Brummel S, . Efficacy and safety of three antiretroviral therapy regimens started in pregnancy up to 50 weeks post partum: A multicentre, open-label, randomised, controlled, phase 3 trial. Lancet HIV 2023;10:e363-e74.37167996

## Substance Identification

### Substance Name

Tenofovir Alafenamide

### CAS Registry Number

379270-37-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antiviral Agents

Anti-HIV Agents

Anti-Retroviral Agents

Reverse Transcriptase Inhibitors